# Bacampicillin

CASRN: 50972-17-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that bacampicillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Bacampicillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Only traces of drug could be detected in breastmilk after a 500 mg oral dose of bacampicillin in 2 women.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Bacampicillin is rapidly converted to ampicillin. Some adverse reactions from ampicillin have been reported. An uncontrolled observation of the breastfed infants of mothers taking ampicillin noted a seeming increase in cases of diarrhea and candidiasis that was attributed to ampicillin in breastmilk.[2]

In a prospective follow-up study, 5 nursing mothers reported taking ampicillin (dosage unspecified). One mother reported diarrhea in her infant. No rashes or candidiasis were reported among the exposed infants.[3]

A small, controlled, prospective study had mothers monitor their infants for signs of adverse effects (furring of the tongue, feeding difficulties, changes in stool frequency and consistency, diaper rash, and skin rash). Weight change and the development of jaundice were also recorded. No statistical differences in these parameters were found between the infants of the control mothers and those of mothers taking ampicillin.[4]

Naproxen possibly caused prolonged bleeding time, thrombocytopenia and acute anemia in one 7-day-old infant in a mother also taking bacampicillin.[5] The role of bacampicillin in this reaction is unknown.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732
2 Williams M. Excretion of drugs in milk. Pharm J 1976;217:219.
3 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
4 Campbell AC, McElnay JC, Passmore CM. The excretion of ampicillin in breast milk and its effect on the suckling infant. Br J Clin Pharmacol 1991;31:230p. doi:10.1111/j.1365-2125.1991.tb05523.x
5 Fidalgo I, Correa R, Gómez Carrasco, JA, et al. Acute anemia, rectorrhagia and hematuria caused by ingestion of naproxen. An Esp Pediatr 1989;30:317-9.2787136

## Substance Identification

### Substance Name

Bacampicillin

### CAS Registry Number

50972-17-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins